# Nipple Piercing

## Drug Levels and Effects

### Summary of Use during Lactation

Although controlled studies have not been performed, piercing of the nipples seems to not interfere with lactation in most cases,[1,2] although poor latching, and milk leakage from the infant's mouth have been reported.[3] Nevertheless, piercing is a risk factor for low milk supply. Some breast jewelry may pierce the areola as well as the nipple. Reversible hyperprolactinemia and galactorrhea occurred in two individuals who developed infections of the nipple and mastitis. Infections are estimated to occur after 10 to 20% of nipple piercings. Healing time after nipple piercing is 6 to 12 months, and up to a year longer if infection or trauma occur. Occasionally, mastitis occurs after piercing.[4] A theoretical concern is aspiration of the nipple jewelry by the nursing infant and injury of the infant's mouth and gums. Although these complications apparently have not been reported, nipple jewelry should be removed before nursing,[3,5,6] and preferably during the entire duration of breastfeeding.[7]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Nipple piercing has caused mastitis in nursing and nonnursing women and at least one man.[3,6,8,9] In some of these patients, hyperprolactinemia and galactorrhea resulted. After removal of the jewelry and treatment of mastitis, hyperprolactinemia and galactorrhea subsided.[8,9] However, in a study of 11 individuals who had pierced nipples for an average of 4 years (range 2.5 to 12 years) without mastitis, serum prolactin values were in the normal range.[10] Nipple piercing has also been associated with decreased lactation in nursing mothers caused by duct obstruction and milk leakage through the piercing tract.[1,3] A study that measured milk production in 460 women found that nipple piercing was a risk factor for low milk supply.[11]

### References

1 Garbin CP, Deacon JP, Rowan MK, et al. Association of nipple piercing with abnormal milk production and breastfeeding. JAMA 2009;301:2550–1.19549971
2 Armstrong ML, Caliendo C, Roberts AE. Pregnancy, lactation and nipple piercings. AWHONN Lifelines 2006;10:212–7.16792708
3 Holbrook J, Minocha J, Laumann A. Body piercing: complications and prevention of health risks. Am J Clin Dermatol 2012;13:1–17.22175301
4 Lee B, Vangipuram R, Petersen E, et al. Complications associated with intimate body piercings. Dermatol Online J 2018;24:2.
5 Kluger N. Body art and pregnancy. Eur J Obstet Gynecol Reprod Biol 2010;153:3–7.20557995
6 Martin J. Is nipple piercing compatible with breastfeeding? J Hum Lact 2004;20:319–21.15296586
7 Roche-Paull R. Body modifications and breastfeeding: What you need to know. J Hum Lact 2015;31:552–3.26185213
8 Modest GA, Fangman JJ. Nipple piercing and hyperprolactinemia. N Engl J Med 2002;347:1626–7.12432057
9 Demirtas Y, Sariguney Y, Cukurluoglu O, et al. Nipple piercing: It is wiser to avoid in patients with hyperprolactinemia. Dermatol Surg 2004;30:1184.15274719
10 Sun GE, Pantalone KM, Gupta M, et al. Is chronic nipple piercing associated with hyperprolactinemia? Pituitary 2013;16:351–3.22965248
11 Jin X, Lai CT, Perrella SL, et al. Defining low milk supply: A data-driven diagnostic framework and risk factor analysis for breastfeeding women. Nutrients 2025;17:3524.41305574

## Substance Identification

### Substance Name

Nipple Piercing

### Drug Class

Breast Feeding

Lactation

Milk, Human

Body Modification, Non-Therapeutic